# Anakinra

CASRN: 143090-92-0

## Drug Levels and Effects

### Summary of Use during Lactation

Anakinra is the pharmaceutical name for recombinant human interleukin-1 receptor antagonist (IL-1Ra). IL-1Ra is a normal component of human milk where it may play a role as an anti-inflammatory agent. Many infants have been breastfed during maternal anakinra therapy, occasionally in conjunction with colchicine, with no obvious adverse effects or infections. Several international guidelines state that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[1-3]

### Drug Levels

Maternal Levels. The concentration of IL-1Ra in colostrum in 88 normal mothers was 672 ng/L, which was higher than the plasma concentration. Mature milk levels were lower than those in colostrum. Samples collected over a period of 2 to 6 months postpartum indicated that mothers continued to excrete IL-1Ra during this time.[4] Mothers with acute mastitis had slightly higher average levels of IL-1Ra than levels after recovery, but the median values were the same. The levels found in these mothers were the same as those of control mothers.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was receiving anakinra 100 mg daily for adult-onset Still's disease during pregnancy and lactation. Her breastfed (extent not stated) infant gained wight and appeared to have normal psychomotor development during an unspecified follow-up period.[6]

Among a cohort of 18 women with term pregnancies treated with anakinra for cryopyrin-associated periodic syndromes during pregnancy, 3 of the women breastfed their infants (extent not stated) for periods of <1 month, 3 months and 1 year. No adverse neonatal outcomes were reported.[7]

In an international multicenter study of mothers exposed to interleukin-1 receptor antagonists, 10 babies were breastfed (extent not stated) by mothers receiving anakinra for up to 10 months. No infections or developmental abnormalities were reported.[8] Three of the cases had been reported previously in reference[7].

Of 5 women who took anakinra during pregnancy, two breastfed their infants while continuing to receive anakinra 100 mg daily. No serious infections were reported and development was normal.[9]

A woman was treated with anakinra 100 mg subcutaneously once daily and oral colchicine 1 mg twice daily during pregnancy and postpartum for familial Mediterranean fever while she breastfed her infant (extent not stated). At 9 months of age, the infant’s development was within normal range. The routine vaccination schedule for the baby was being performed on time and there was no history of infection in the infant.[10]

A woman with juvenile idiopathic arthritis was treated until 19 weeks of pregnancy with anakinra 100 mg daily by subcutaneous injection. It was discontinued for the duration of the pregnancy and then restarted 2 weeks after delivery while she partially breastfed her infant. No adverse reactions were reported.[11]

A woman with recurrent pericarditis was treated with subcutaneous anakinra 100 mg once weekly beginning in the fifth month of pregnancy and continuing postpartum. She also took colchicine 0.5 mg daily. She delivered twins by cesarean section at 36 weeks of gestation and breastfed (extent not stated) her infants up to 18 months of age. No health problems were noted in the infants up to 18 months of age.[12]

A woman with persistent colchicine-resistant pericarditis took anakinra throughout her pregnancy and at a dose of 100 mg twice weekly during breastfeeding (extent not stated) for 12 months and is still following this regimen. The child’s growth and development were normal with no reported infections or developmental abnormalities.[13]

A case series reported 10 mothers from 4 European countries who were treated with anakinra for pericarditis who breastfed their infants (extent not stated), including one woman who breastfed two infants following 2 pregnancies. Doses ranged from 100 mg once a week to 100 mg once daily. Two of the women also took colchicine 1 mg daily. The infants had no reported infections or developmental abnormalities.[14]

A French teratogen information service reviewed all patients exposed to anakinra during pregnancy over a 16-year period. In 3 retrospective and 5 prospective cases mothers breastfed while taking anakinra. No notable effects were reported in the infants. The extent of breastfeeding was not reported for most cases, but among the retrospectively followed cases, one mother breastfed for 12 months and one for 18 months. Follow-up was 22 and 51 months in two infants.[15]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56 32090480
2 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48-e88 36318966
3 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910-26 40287311
4 Buescher ES, Malinowska I. Soluble receptors and cytokine antagonists in human milk. Pediatr Res 1996;40:839-44 8947960
5 Buescher ES, Hair PS. Human milk anti-inflammatory component contents during acute mastitis. Cell Immunol 2001;210:87-95 11520075
6 Berger CT, Recher M, Steiner U, et al. A patient's wish: Anakinra in pregnancy. Ann Rheum Dis 2009;68:1794-5 19822718
7 Chang Z, Spong CY, Jesus AA, et al. Anakinra use during pregnancy in patients with cryopyrin-associated periodic syndromes (CAPS). Arthritis Rheumatol 2014;66:3227-32 25223501
8 Youngstein T, Hoffmann P, Gul A, et al. International multi-centre study of pregnancy outcomes with interleukin-1 inhibitors. Rheumatology (Oxford) 2017;56:2102-8 28968868
9 Smith CJF, Chambers CD. Five successful pregnancies with antenatal anakinra exposure. Rheumatology (Oxford) 2018;57:1271-5 29660063
10 Duman NC, Goren MZ, Karaalp A. Anakinra use during pregnancy and lactation: A case report. Reprod Toxicol 2019;88:139-40.doi:10.1016/j.reprotox.2019.05.029
11 Khokhar F, Pavlova V. Anakinra exposure in a pregnant patient with juvenile idiopathic arthritis: A case report. J Rheumatol 2019;46:830.doi:10.3899/jrheum.190333
12 Negro E, Costedoat-Chalumeau N, Nivuori M, et al. Anakinra during pregnancy in a difficult to treat case of recurrent pericarditis. Can J Cardiol 2023;39:1152-3 36306922
13 Cerne Cercek A, Gomiscek Novak A, Trojner Bregar A, et al. Anakinra during pregnancy and lactation for corticosteroid-dependant colchicine-resistant recurrent pericarditis in a patient with neutralizing anti-interleukin-1 receptor antagonist antibodies: a case report. Eur Heart J Case Rep 2025;9:ytaf280 40585191
14 Trotta L, Mascolo R, Mardygan V, et al. Use of anakinra during pregnancy and breastfeeding in women with recurrent pericarditis: A case series. Eur J Obstet Gynecol Reprod Biol 2025;312:114553 40609313
15 Faure-Bardon V, Beghin D, Fautrel B, et al. Exposure during pregnancy to Il-1 targeted therapies and pregnancy, fetal and neonatal outcomes: A study from the French Teratology Information Service. Rheumatology (Oxford) 2025;64:6106-13 40650931

## Substance Identification

### Substance Name

Anakinra

### CAS Registry Number

143090-92-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Anti-Inflammatory Agents

Cytokines